# Clascoterone

CASRN: 19608-29-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of clascoterone during breastfeeding. However, because it is poorly absorbed from the skin and 84% to 89% protein bound, amounts in breastmilk are probably low and would not be expected to cause any adverse effects in breastfed infants. Avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Clascoterone

### CAS Registry Number

19608-29-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Androgen Antagonists

Androgen Receptor Antagonists